# Botulinum Poisoning

## Drug Levels and Effects

### Summary of Use during Lactation

It is unlikely that botulinum toxin enters breastmilk because of its high molecular weight of about 150,000 Da. Three infants have been safely breastfed during maternal botulism poisoning. Infants of breastfeeding mothers should be monitored closely for signs and symptoms of botulism such as low muscle tone, a weak cry, gastrointestinal symptoms, or difficulty feeding and swallowing. The Centers for Disease Control and Prevention recommends that if the decision is made to temporarily stop breastfeeding, the mother should express her milk and discard it until she receives the antitoxin. Breastfeeding can continue while receiving botulinum antitoxin. Monitor breastfed infants for signs of adverse impacts from botulinum antitoxin including flu-like symptoms, such as fevers, chills, and malaise.

### Drug Levels

Maternal Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. The mother was given 2 vials of trivalent botulism antitoxin, 1 intravenously and 1 intramuscularly. A milk sample obtained 4 hours after administration of the antitoxin had no detectable botulinum toxin nor botulism organisms.[1]

Infant Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. No botulinum toxin was detected in the infant’s blood or stool on the day the mother was admitted to the hospital and no botulism organisms were detected in the infant’s stools.[1]

### Effects in Breastfed Infants

The three breastfeeding women who safely breastfed their children while ill with botulism are briefly described in the literature. One mother with severe type A foodborne botulism breastfed her infant aged 8 months while acutely ill with cranial nerve palsies, weakness, and shortness of breath that required intubation and respiratory support for 2 weeks. Neither C. botulinum nor botulinum toxin were identified in her breastmilk, which was obtained for testing on the third day of her illness, 4 hours after she received trivalent ABE botulinum antitoxin. The infant was reportedly breastfed throughout the mother’s illness, including before the mother received antitoxin, and did not develop any signs or symptoms of botulism. The infant did not receive antitoxin, C. botulinum was not identified in the infant’s stool, and botulinum toxin was not identified in the infant’s stool or serum collected on the third day of the mother’s illness. Another case involved an infant aged 2 months who breastfed while the mother was acutely ill with botulism. The mother was reported to have died from type A botulism; however, the signs and symptoms she experienced were not specified. The infant did not develop any signs or symptoms of botulism. The study did not specify whether the infant received testing. Another infant aged 2 months breastfed without becoming symptomatic while the mother was acutely ill with type B botulism. The mother had cranial nerve palsies and generalized weakness, and required a tracheostomy. The infant received antitoxin (timing of antitoxin not specified) and remained asymptomatic. The study did not specify whether the infant received testing.[2,3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Middaugh J. Botulism and breast milk. N Engl J Med 1978;298:343.
2 Rao AK, Sobel J, Chatham-Stephens K, . Clinical guidelines for diagnosis and treatment of botulism, 2021. MMWR Recomm Rep 2021;70:1-30.
3 Douthirt C. An outbreak of botulism in Tucumcari, New Mexico. Southwest Med 1938:51-3.

## Substance Identification

### Substance Name

Botulinum Poisoning

### Drug Class

Breast Feeding

Lactation

Milk, Human

Foodborne Diseases

Poisoning